# Deep Brain Stimulation

## Drug Levels and Effects

### Summary of Use during Lactation

Evidence from a few mothers who received deep brain stimulation indicated that no difficulty was encountered with lactation, other than minor discomfort with chest neurostimulators.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a case series of pregnant patients treated for dystonia with deep brain stimulation (DBS), 4 of 5 mothers breastfed their 6 infants (1 set of twins and 2 siblings) with no apparent difficulty. One mother chose not to breastfeed, unrelated to DBS. Two mothers reported minor discomfort during breastfeeding with chest neurostimulators.[1]

### References

1 Ziman N, Coleman RR, Starr PA, et al. (2016). Pregnancy in a series of dystonia patients treated with deep brain stimulation: Outcomes and management recommendations. Stereotact Funct Neurosurg.

## Substance Identification

### Substance Name

Deep Brain Stimulation

### Drug Class

Breast Feeding

Lactation

Electric Stimulation Therapy